# Papaverine

CASRN: 58-74-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of papaverine during breastfeeding. If a mother requires papaverine, it is not a reason to discontinue breastfeeding. Until more data become available, papaverine should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. If papaverine is used, monitor the infant for sedation and poor feeding, especially in younger, exclusively breastfed infants.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Papaverine

### CAS Registry Number

58-74-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Phosphodiesterase Inhibitors

Vasodilator Agents

Urological Agents